# Docusate

CASRN: 10041-19-7

## Drug Levels and Effects

### Summary of Use during Lactation

Docusate is minimally absorbed from the gastrointestinal tract and therefore the drug is unlikely to be found in the maternal serum or breastmilk.[1] Laxatives that are completely unabsorbed may be preferred.[2]

### Drug Levels

Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a randomized, blinded trial, 35 postpartum breastfeeding patients received a laxative containing docusate in a dose of 120 mg daily in addition to danthron 100 mg daily. One patient stated that diarrhea occurred in her breastfed infant.[3] The diarrhea was most likely caused by the danthron.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Bisacodyl, Magnesium Hydroxide, Psyllium, Senna

### References

1 Mahadevan U, Kane S. American Gastroenterological Association Institute Technical Review on the Use of Gastrointestinal Medications in Pregnancy. Gastroenterology 2006;131:283-311.16831611
2 Lewis JH, Weingold AB and the Committee of FDA-Related Matters American College of Gastroenterology. The use of gastrointestinal drugs during pregnancy and lactation. Am J Gastroenterol 1985;80:912-23.2864852
3 Greenhalf JO, Leonard HS. Laxatives in the treatment of constipation in pregnant and breast-feeding mothers. Practitioner 1973;210:259-63.4570522

## Substance Identification

### Substance Name

Docusate

### CAS Registry Number

10041-19-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Gastrointestinal Agents

Laxatives

Surface-Active Agents